# Calcitonin

CASRN: 21215-62-3

## Drug Levels and Effects

### Summary of Use during Lactation

Little information is available on the clinical use of calcitonin during breastfeeding; however, calcitonin is a normal component of human milk where may play a role in development of enteric neurons in the breastfed infant.[1-3] Because it is a large peptide, absorption by the infant is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If calcitonin is required by the mother, it is not a necessarily reason to discontinue breastfeeding calcitonin therapy is sometimes used to treat symptomatic postpartum osteoporosis, which is often treated in part by stopping lactation to reduce calcium loss.[4,5] There is no evidence that exogenous calcitonin decreases serum prolactin or lactation in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with discoid lupus was taking subcutaneous calcitonin 0.5 mL every other day, azathioprine 100 mg daily, warfarin 2.5 mg every 2 days, prednisone 10 mg daily, calcitriol 0.25 mcg every 2 days, acetaminophen 650 mg twice daily, and calcium, vitamin E, and vitamin C. She was specifically evaluated for the safety of azathioprine during lactation, but continued to nurse for 12 months. Infant follow-up at 15 months of age found normal growth and development.[6]

### Effects on Lactation and Breastmilk

Calcitonin products contain a warning that it should be avoided in nursing mothers because of animal data indicating that calcitonin can lower serum prolactin. The only human data consist of small studies performed in men and nonlactating w omen, some with normal and some with elevated serum prolactin. Several of the studies found a decrease in serum prolactin after calcitonin infusion.[7-10] Another small study found that IV infusion of human calcitonin did not lower serum prolactin in healthy volunteers who had normal serum prolactin at baseline.[11] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77-149.7709605
2 Bucht E, Telenius-Berg M, Lundell G, et al. Immunoextracted calcitonin in milk and plasma from totally thyroidectomized women. Evidence of monomeric calcitonin in plasma during pregnancy and lactation. Acta Endocrinol (Copenh) 1986;113:529-35.3788423
3 Ballard O, Morrow AL. Human milk composition: Nutrients and bioactive factors. Pediatr Clin North Am 2013;60:49-74.23178060
4 Segal E, Hochberg I, Weisman Y, et al. Severe postpartum osteoporosis with increased PTHrP during lactation in a patient after total thyroidectomy and parathyroidectomy. Osteoporos Int 2011;22:2907-11.21243337
5 Michalakis K, Peitsidis P, Ilias I. Pregnancy- and lactation-associated osteoporosis: A narrative mini-review. Endocr Regul 2011;45:43-7.21314210
6 Moretti ME, Verjee Z, Ito S, et al. Breast-feeding during maternal use of azathioprine. Ann Pharmacother 2006;40:2269-72.17132809
7 Carman JS, Wyatt RJ. Reduction of serum-prolactin after subcutaneous salmon calcitonin. Lancet 1977;1:1267-8.68374
8 Isaac R, Merceron R, Caillens G, et al. Effects of calcitonin on basal and thyrotropin-releasing hormone-stimulated prolactin secretion in man. J Clin Endocrinol Metab 1980;50:1011-5.6768762
9 Ziliotto D, Luisetto G, Heynen G, et al. Decrease in serum prolactin levels after acute intravenous injection of salmon calcitonin in normal subjects. Horm Metab Res 1981;13:64-7. doi:10.1055/s-2007-1019173
10 Žofková I, Nedvídková J. Hypercalcaemia and calcitonin inhibit prolactin secretion. Exp Clin Endocrinol 1984;84:294-8.6441727
11 Stevenson JC, Evans IM, Colston KW, et al. Serum-prolactin after subcutaneous human calcitonin. Lancet 1977;2:711-2.71517

## Substance Identification

### Substance Name

Calcitonin

### CAS Registry Number

9007-12-9; 47931-85-1; 21215-62-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bone Density Conservation Agents

Neuropeptides

Peptide Hormones